# Amoxicillin

CASRN: 26787-78-0

## Drug Levels and Effects

### Summary of Use during Lactation

Amoxicillin produces low levels in milk that are not expected to cause adverse effects in breastfed infants. Occasionally, rash and disruption of the infant's gastrointestinal flora, resulting in diarrhea or thrush, have been reported, but these effects have not been adequately evaluated. Amoxicillin is acceptable in nursing mothers. Amoxicillin powder for suspension reconstituted with breastmilk is absorbed as well as the powder reconstituted with water.[1]

### Drug Levels

Maternal Levels. After a single 1 gram oral dose of amoxicillin in 6 women, peak milk amoxicillin levels occurred 4 to 5 hours after the dose. Average milk levels were 0.69 mg/L (range 0.46 to 0.88 mg/L) at 4 hours and 0.81 mg/L (range 0.39 to 1.3 mg/L) at 5 hours after the dose.[2] Using these data, an exclusively breastfed infant would be expected to receive a maximum daily dosage of about 0.1 mg/kg of amoxicillin with a maternal dose of 500 mg three times daily. This amounts to 0.25 to 0.5% of a typical infant amoxicillin dosage.

A study involving 25 breastfeeding mothers who had been taking amoxicillin for at least 2 days, with infants older than 4 weeks had 75 milk samples collected at multiple time points following amoxicillin administration. Pharmacokinetic modeling and Monte Carlo simulations were conducted to estimate the RID based on a maternal dosage of 6 grams daily as a worst-case scenario. The RID based on adult or pediatric dosages remained <0.4% for both measured and simulated concentrations.[3]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

In a telephone follow-up study, 25 nursing mothers reported taking amoxicillin (dosage unspecified). Three mothers reported diarrhea in their infants. No rashes or candidiasis were reported among the exposed infants.[4]

In contrast, a small, controlled, prospective study had mothers monitor their infants for signs of adverse effects (furring of the tongue, feeding difficulties, changes in stool frequency and consistency, diaper rash, and skin rash). Weight change and the development of jaundice were also recorded. No statistical differences in these parameters were found between the infants of the control mothers and those of mothers taking the related antibiotics, ampicillin or ampicillin-clavulanate.[5]

A prospective, controlled study asked mothers who called an information service about adverse reactions experienced by their breastfed infants. Of 40 infants exposed to amoxicillin in breastmilk, 2 developed diarrhea and 1 developed a rash.[6]

A study compared the breastfed infants of mothers taking amoxicillin to those taking a macrolide antibiotic. Adverse reactions occurred in 8.3% of the infants exposed to amoxicillin, which was similar to the rate in macrolide-exposed infants. Reactions included rash and somnolence.[7]

A 2-month-old infant was breastfed since birth. His mother had taken many medications during pregnancy, but she did not recall their identity. She developed mastitis and was treated with amoxicillin/clavulanic acid 1 gram orally every 12 hours and gentamicin 160 mg intramuscularly once daily. The infant was breastfed for 10 minutes starting 15 minutes after the first dose of both drugs. About 20 minutes later, the infant developed a generalized urticaria which disappeared after 30 minutes. A few hours later, the infant breastfed again and the urticaria reappeared after 15 minutes and disappeared after an hour. After switching to formula feeding and no further infant exposure to penicillins, the reaction did not reappear with follow-up to 16 months of age. The adverse reaction was probably caused by the antibiotics in breastmilk. The drug that caused the reaction cannot be determined, but it was most likely the amoxicillin/clavulanic acid.[8]

A mother was taking amoxicillin, and acetaminophen plus codeine. She reported that her 11-month-old infant breastfed (extent not known) experienced diarrhea. The reaction was rated as possible or probable, but mild.[9]

A study of 25 breastfeeding mothers who had been taking amoxicillin for at least 2 days, with infants older than 4 weeks had 75 milk samples collected at multiple time points following amoxicillin administration. No adverse effects were reported in infants.[3]

### Effects on Lactation and Breastmilk

A study of 25 breastfeeding mothers who had been taking amoxicillin for at least 2 days, with infants older than 4 weeks had 75 milk samples collected at multiple time points following amoxicillin administration. No impact was reported on maternal milk supply.[3]

### References

1 Yazdani-Brojeni P, García-Bournissen F, Fujii H, et al. Relative bioequivalence of amoxicillin dissolved in breast milk. Arch Dis Child 2014;99:258–61.24363363
2 Kafetzis DA, Siafas CA, Georgakopoulos PA, et al. Passage of cephalosporins and amoxicillin into the breast milk. Acta Paediatr Scand 1981;70:285–8.7246123
3 Baklouti S, Rigourd V, Panchaud A, et al. Population pharmacokinetic modelling of amoxicillin in human breast milk-A contribution from the ConcePTION project. Br J Clin Pharmacol 2026;92:1833–44.41582095
4 Ito S, Blajchman A, Stephenson M, et al. Prospective follow-up of adverse reactions in breast-fed infants exposed to maternal medication. Am J Obstet Gynecol 1993;168:1393–9.8498418
5 Campbell AC, McElnay JC, Passmore CM. The excretion of ampicillin in breast milk and its effect on the suckling infant. Br J Clin Pharmacol 1991;31:230p. doi:10.1111/j.1365-2125.1991.tb05523.x
6 Benyamini L, Merlob P, Stahl B, et al. The safety of amoxicillin/clavulanic acid and cefuroxime during lactation. Ther Drug Monit 2005;27:499–502.16044108
7 Goldstein LH, Berlin M, Tsur L, et al. The safety of macrolides during lactation. Breastfeed Med 2009;4:197–200.19366316
8 Cherif F, El Aidli, S, Kastalli S, et al. Drug induced urticaria via breastfeeding. Fundam Clin Pharmacol 2009;23 (Suppl. 1):37. doi:10.1111/j.1472-8206.2009.00689.x
9 Morze K, Szałek E, Waszyk-Nowaczyk M. Minding the gap. Drug-related problems among breastfeeding women. Front Pharmacol 2025;16:1542269.40183105

## Substance Identification

### Substance Name

Amoxicillin

### CAS Registry Number

26787-78-0

### Drug Class

Breast Feeding

Lactation

Milk, Human

Anti-infective Agents

Antibacterial Agents

Penicillins